# Hydrochlorothiazide

CASRN: 58-93-5

## Drug Levels and Effects

### Summary of Use during Lactation

Hydrochlorothiazide doses of 50 mg daily or less are acceptable during lactation. Intense diuresis with large doses may decrease breastmilk production.

### Drug Levels

Maternal Levels. In a mother who was 28 days postpartum, hydrochlorothiazide reached a peak milk level of about 275 mcg/L at about 3 hours after a 50 mg oral dose. The infant received a daily dosage of about 2% of the mother's weight-adjusted dose.[1]

Infant Levels. Hydrochlorothiazide was not detectable (<20 mcg/L) in the serum of a 28-day-old breastfed infant at about 2 and 11 hours after the mother's dose.[1]

### Effects in Breastfed Infants

No electrolyte abnormalities were noted in one 28-day-old infant who was breastfed since birth while his mother was taking oral hydrochlorothiazide 50 mg daily.[1]

### Effects on Lactation and Breastmilk

Hydrochlorothiazide in dosages of 100 mg daily in the morning and 50 mg in the afternoon or 50 mg twice daily have been used to successfully to suppress lactation at various times postpartum.[2,3] Intense diuresis with thiazides and thiazide-like diuretics, fluid restriction and breast binding have been used to suppress postpartum lactation.[2,4,5] The added contribution of the diuretic to these measures, which are effective in suppressing lactation, has not been studied. There are no data on the effects of diuretics on established, ongoing lactation.

In a pilot study of the treatment of patients with postpartum hypertension, patients were randomized to either 12.5 mg hydrochlorothiazide plus 10 mg of lisinopril (n = 31) or 30 mg of nifedipine (n = 36) daily. The dosages could be increased to 12.5 mg hydrochlorothiazide plus 20 mg of lisinopril and then to 25 mg hydrochlorothiazide with 20 mg lisinopril. Nifedipine dosage was increased in 30 mg increments to a maximum daily dose of 120 mg daily. At discharge, 21 hydrochlorothiazide-lisinopril mothers (70%) were breastfeeding while19 nifedipine mothers (53%) were breastfeeding.[6]

### Alternate Drugs to Consider

Chlorothiazide

### References

1 Miller ME, Cohn RD, Burghart PH. Hydrochlorothiazide disposition in a mother and her breast-fed infant. J Pediatr 1982;101:789–91.7131161
2 Stout G. Suppression of lactation. Br Med J 1962;1:1150.18117911
3 Reisfield DR, Paret FL. Value of a diuretic in suppressing breast engorgement. J Med Soc N J 1966;63:458–61.5341754
4 Healy M. Suppressing lactation with oral diuretics. Lancet 1961;277:1353–4. doi:10.1016/S0140-6736(61)90289-6
5 Reiher KH. Suppression of lactation by stimulation of diuresis. Zentralbl Gynakol 1963;85:188–90.13973786
6 Fishel Bartal M, Blackwell SC, Pedroza C, et al. Oral combined hydrochlorothiazide and lisinopril vs nifedipine for postpartum hypertension: a comparative-effectiveness pilot randomized controlled trial. Am J Obstet Gynecol 2023;228:571.e1–.e10.

## Substance Identification

### Substance Name

Hydrochlorothiazide

### CAS Registry Number

58-93-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Thiazide Diuretics